# Dabigatran

CASRN: 211914-51-1

## Drug Levels and Effects

### Summary of Use during Lactation

In adults, less than 7% of dabigatran is absorbed orally in its prodrug form of dabigatran etexilate mesylate; dabigatran itself is not absorbed orally. Preliminary data indicate that dabigatran is poorly excreted into breastmilk and undetectable in breastfed infant plasma. If the mother requires dabigatran, it is not a reason to discontinue breastfeeding. Because data are limited, monitor preterm or newborn infants for signs of bleeding.[1,2]

### Drug Levels

Maternal Levels. In preliminary results from a study on dabigatran in breastmilk, two patients received oral dabigatran etexilate 220 mg (2.5 and 2.7 mg/kg dabigatran). Dabigatran was first detectable in milk 2 to 3 hours after the dose. Peak milk levels occurred at 7 hours after the dose. Milk concentrations at this time were 8.2 mcg/L and 52.6 mcg/L, respectively. Average maximum estimated daily infant dosages on day 5 postpartum were 0.35 and 2.7 mcg/kg, respectively. These values corresponded to weight-adjusted dosages of 0.01 and 0.07% of the maternal dosage. On days 1 and 3 postpartum, estimated dosages were somewhat less.[1] A preliminary physiologically based pharmacokinetic model was validated using these patients’ data predicted a steady-state RID of 0.013% with a daily dose of 220 mg of dabigatran etexilate mesylate.[3]

A postpartum woman was prescribed dabigatran etexilate 220 mg once daily for 7 days for primary VTE prophylaxis. She took her dose for 3 days in the afternoon, then at 7 am on the next day when a milk sample was taken at 9 am. The concentration in milk was below the lower limit of quantification (< 2.3 mcg/L).[4]

Infant Levels. A postpartum woman was prescribed dabigatran etexilate 220 mg once daily for 7 days for primary VTE prophylaxis. She took her dose for 3 days in the afternoon, then at 7 am on the next day when an infant plasma sample was taken at 9 am. The infant plasma concentration of dabigatran was below the detection limit (< 2 mcg/L).[4]

### Effects in Breastfed Infants

Samples of newborn and preterm infant blood spiked with of dabigatran in the concentrations found in breastmilk after a 220 mg dose of dabigatran etexilate indicate that no effect on coagulation would occur.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Ayuk P, Kampouraki E, Truemann A, et al. Investigation of dabigatran secretion into breast milk: Implications for oral thromboprophylaxis in post-partum women. Am J Hematol 2020;95:E10–E3.31599003
2 Daei M, Khalili H, Heidari Z. Direct oral anticoagulant safety during breastfeeding: A narrative review. Eur J Clin Pharmacol 2021;77:1465–71.33963877
3 Ogungbenro K, Aucott L, Kamali F, et al. Translation of a physiologically-based pharmacokinetic model for dabigatran etexilate to the design of a safety and efficacy study in post-partum women. Br J Clin Pharmacol 2026;92:1109–16.41273069
4 Green RW, Saleh A, Baranczewski P. Dabigatran concentrations in an actively breastfeeding mother-infant dyad: Extending the evidence for oral thromboprophylaxis postpartum. Am J Hematol 2026;101:1628–31.41992716

## Substance Identification

### Substance Name

Dabigatran

### CAS Registry Number

211914-51-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins